# Dronabinol

CASRN: 1972-08-3

## Drug Levels and Effects

### Summary of Use during Lactation

Dronabinol is the synthetic form of delta-9-tetrahydrocannabinol (THC), the major active component of cannabis. Low levels of THC are found in the breastmilk of mothers who use cannabis products.[1-5] If a mother requires dronabinol, it is not a reason to discontinue breastfeeding, but because no published information is available with dronabinol use as an antiemetic during breastfeeding, an alternate antiemetic is preferred. For further information, see the LactMed record on Cannabis.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Meclizine, Metoclopramide, Prochlorperazine, Thiethylperazine

### References

1 Bertrand KA, Hanan NJ, Honerkamp-Smith G, et al. Marijuana use by breastfeeding mothers and cannabinoid concentrations in breast milk. Pediatrics 2018;142:e20181076 30150212
2 Baker T, Datta P, Rewers-Felkins K, et al. Transfer of inhaled cannabis into human breast milk. Obstet Gynecol 2018;131:783-8 29630019
3 Wymore EM, Palmer C, Wang GS, et al. Persistence of Δ-9-tetrahydrocannabinol in human breast milk. JAMA Pediatr 2021;175:632-4 33683306
4 Moss MJ, Bushlin I, Kazmierczak S, et al. Cannabis use and measurement of cannabinoids in plasma and breast milk of breastfeeding mothers. Pediatr Res 2021;90:861-8 33469174
5 Holdsworth EA, Berim A, Gang DR, et al. Human milk cannabinoid concentrations and associations with maternal factors: The Lactation and Cannabis (LAC) study. Breastfeed Med 2024;19:515-24 38695182

## Substance Identification

### Substance Name

Dronabinol

### CAS Registry Number

1972-08-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Cannabinoids